# Sodium Phosphate P 32

CASRN: 7635-46-3

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of sodium phosphate P 32 as a therapeutic agent. No information is available on the use of sodium phosphate P 32 during breastfeeding. The European Association of Nuclear Medicine recommends using other modalities to treat polycythemia vera and essential thrombocytopenia in patients under 60 to 65 years of age and states that the drug is contraindicated in nursing mothers.[1] If a nursing mother is given sodium phosphate P 32 systemically, breastfeeding should be discontinued permanently for this child.

### Drug Levels

Phosphorus P 32 decays by beta emission with an energy of 1.709 MeV and a half-life of 14.3 days. Radioactivity declines with an effective half-life of 11 days after injection of sodium phosphate P 32.[2]

Maternal Levels. A mother was given 37 MBq of phosphorus P 32 intravenously for diagnosis of a malignant tumor in the eye. Two breastmilk samples were collected, one a few hours after the injection and another on the following day. The first milk sample contained 0.005% of the injected radioactivity per liter and the second day's milk contained 0.016% of the injected radioactivity per liter.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Tennvall J, Brans B. (2007). EANM procedure guideline for 32P phosphate treatment of myeloproliferative diseases. Eur J Nucl Med Mol Imaging.
2 Mountford PJ, Wells CP, Hall FM, et al. (1984). Potential radiation dose to a breast-fed infant following administration of sodium 32P-phosphate to the mother. Nucl Med Commun.

## Substance Identification

### Substance Name

Sodium Phosphate P 32

### CAS Registry Number

7635-46-3

### Drug Class

Breast Feeding

Lactation

Radiopharmaceuticals

Phosphorus Radioisotopes